# Diroximel Fumarate

CASRN: 1577222-14-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of diroximel fumarate during breastfeeding. However, amounts of the active metabolite of diroximel fumarate, monomethyl fumarate, in breastmilk appear to be low and would not be expected to cause any adverse effects in breastfed infants. Based on clinical data in over 20 infants exposed to dimethyl fumarate in breastmilk, diroximel fumarate is acceptable to use during breastfeeding, at least after one month of age.[1] Breastfed infants should be monitored for adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants. Some authors also recommend monitoring breastfed infants for flushing, vomiting and diarrhea.[2,3]

### Drug Levels

Diroximel fumarate is not found in the plasma because it is rapidly converted to the active drug, monomethyl fumarate, which has a half-life of about 1 hour.

Maternal Levels. Two nursing mothers with relapsing-remitting multiple sclerosis began the closely related drug dimethyl fumarate 240 mg orally twice daily after discontinuing breastfeeding. They continued pumping milk and on day 8 of therapy, they each provided milk samples at 1, 2, 4, 8 and 12 hours after a dose. Peak monomethyl fumarate milk levels were 3.7 mcg/L in one mother and 11.2 mcg/L in the other and occurred at about 2 hours after the dose. Average milk levels were 2.7 mcg/L and 7.5 mcg/L, respectively. These values indicate that the infants would receive daily dosages of about 0.8 mcg/kg and 1.13 mcg/kg, respectively, or weight-adjusted relative infant dosages of 0.007% and 0.019% of the maternal dosage.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Twenty-six women taking dimethyl fumarate for relapsing-remitting multiple sclerosis were followed during 29 pregnancies from 2015 to 2020. Dimethyl fumarate was administered through week 24 of pregnancy and resumed 1 month after delivery. Twenty-two of 26 mothers breastfed (extent not stated) for 4 to 7 months. Infants were monitored up to the third year of life for infections and developmental disorders. All children were the 70th and 95th percentile for height and weight. The authors concluded that continuing dimethyl fumarate while breastfeeding is safe,[1] although infants were not exposed during the first month of life.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Multiple Sclerosis) Glatiramer, Immune Globulin, Interferon Beta

### References

1 Borriello G, Ianniello A. Efficacy, safety and tolerability of dimethylfumarate during pregnancy and breastfeeding. Mult Scler Relat Disord 2022;67:103949. doi:10.1016/j.msard.2022.103951
2 Almas S, Vance J, Baker T, et al. Management of multiple sclerosis in the breastfeeding mother. Mult Scler Int 2016;2016:6527458.26966579
3 Ciplea AI, Datta P, Rewers-Felkins K, et al. Dimethyl fumarate transfer into human milk. Ther Adv Neurol Disord 2020;13:1756286420968414.33193814

## Substance Identification

### Substance Name

Diroximel Fumarate

### CAS Registry Number

1577222-14-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Dermatologic Agents

Immunosuppressive Agents

Radiation-Sensitizing Agents